# Levobupivacaine

CASRN: 27262-47-1

## Drug Levels and Effects

### Summary of Use during Lactation

Levobupivacaine is no longer marketed in the US. Levels in breastmilk are low, and it is poorly absorbed orally by the infant. Bupivacaine, the racemic mixture of dextro- and levobupivacaine, has not caused any adverse effects in breastfed infants.

Local anesthetics during labor and delivery with other anesthetics and analgesics has been reported by some to interfere with breastfeeding. However, this assessment is controversial and complex because of the many different combinations of drugs, dosages and patient populations studied as well as the variety of techniques used. In contrast, epidural local anesthetics begun after clamping of the umbilical cord appears to enhance breastfeeding success because of improved pain control. Overall, it appears that with good breastfeeding support epidural levobupivacaine with or without fentanyl or one of its derivatives has little or no adverse effect on breastfeeding success.[1-6] Labor Labor pain medication may delay the onset of lactation. In one study, adding levobupivacaine wound infiltration to multimodal analgesia after cesarean section improved breastfeeding comfort.

### Drug Levels

Maternal Levels. Twenty women undergoing cesarean section deliveries with epidural anesthesia were randomized to receive either levobupivacaine 0.5% (n = 10) or bupivacaine 0.5% (n = 10) in a single-blinded study. The drugs were given as 0.5 mL (2.5 mg) boluses as needed up to 150 mg (mean 80 mg). Blood and milk samples were obtained before and 0.5, 1, 2, 6, 12 and 24 hours after administration of the drugs. Levobupivacaine was detected in breastmilk 30 minutes after administration, with the peak milk concentration of about 0.25 mg/L occurring at about 2 hours after administration. Levobupivacaine was almost at baseline level by 7 hours and absent from milk (<5 mcg/L) by 24 hours after the dose. The passage of racemic bupivacaine into breastmilk was virtually identical.[7]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information on levobupivacaine was not found as of the revision date. However, bupivacaine administered to the mother by intrapleural or epidural routes had no effect on 13 breastfed infants.[8]

### Effects on Lactation and Breastmilk

A nonrandomized convenience sample of women who did (n = 209) or did not (n = 157) receive epidural analgesia during labor was analyzed to determine whether epidurals affected the onset of lactation. Although not standardized, the typical procedure used sufentanil 10 to 15 mg together with either ropivacaine 0.1% or levobupivacaine 0.0625% epidurally, supplemented by epidural boluses of ropivacaine 0.1% or levobupivacaine 0.0625% about every 2 hours. No difference was found in the time of lactation onset between the two groups. Although women in both groups stated they wished to breastfeed prior to delivery, exclusive breastfeeding at 20 days postpartum was less frequent in the women who received an epidural (43%) than in women who did not (57%).[9]

A randomized, unblinded study of women undergoing cesarean section found that women who received postoperative wound infiltration with levobupivacaine. A bolus of 50 mg was infused subfascially 5 cm lateral to the wound incision, followed by 6.25 mg/hour for 48 hours. Additional analgesia included acetaminophen, celecoxib, nefopam, morphine and droperidol. On day 2 postpartum, women who received the levobupivacaine infusion reported more comfort with breastfeeding. More women who received the levobupivacaine were breastfeeding on day 2, but the difference was not statistically significant.[10]

A retrospective medical record study in China compared women who received patient-controlled epidural analgesia during labor (n = 527) to those who did not (n = 395). Epidural analgesia included 0.1% levobupivacaine and 5 mg of sufentanil in 10 mL of saline. All women completed a questionnaire regarding their breastfeeding experience at 6 months postpartum. There were no statistically significant differences between the groups in the proportion who initiated breastfeeding within 1 hour after birth or who exclusively or partially breastfed their infants at 1, 3, or 6 months postpartum.[11]

### Alternate Drugs to Consider

Lidocaine, Ropivacaine

### References

1 Reynolds F. (2011). Labour analgesia and the baby: Good news is no news. Int J Obstet Anesth.
2 Loubert C, Hinova A, Fernando R. (2011). Update on modern neuraxial analgesia in labour: A review of the literature of the last 5 years. Anaesthesia.
3 Shrestha B, Devgan A, Sharma M. (2014). Effects of maternal epidural analgesia on the neonate--a prospective cohort study. Ital J Pediatr.
4 Zuppa AA, Alighieri G, Riccardi R, et al. (2014). Epidural analgesia, neonatal care and breastfeeding. Ital J Pediatr.
5 French CA, Cong X, Chung KS. (2016). Labor epidural analgesia and breastfeeding: A systematic review. J Hum Lact.
6 Heesen P, Halpern SH, Beilin Y, et al. (2020). Labor neuraxial analgesia and breastfeeding: An updated systematic review. J Clin Anesth.
7 Bolat E, Bestas A, Bayar MK, et al. (2014). Evaluation of levobupivacaine passage to breast milk following epidural anesthesia for cesarean delivery. Int J Obstet Anesth.
8 Ortega D, Viviand X, Lorec AM, et al. (1999). Excretion of lidocaine and bupivacaine in breast milk following epidural anesthesia for cesarean delivery. Acta Anaesthesiol Scand.
9 Mauri PA, Contini NN, Giliberti S, et al. (2015). Intrapartum epidural analgesia and onset of lactation: A prospective study in an Italian birth centre. Matern Child Health J.
10 Jolly C, Jathieres F, Keita H, et al. (2015). Cesarean analgesia using levobupivacaine continuous wound infiltration: A randomized trial. Eur J Obstet Gynecol Reprod Biol.
11 Xu Q, Wu ZF, Yang NN, et al. (2020). Impact of epidural analgesia during labor on breastfeeding initiation and continuation: A retrospective study. J Matern Fetal Neonatal Med.

## Substance Identification

### Substance Name

Levobupivacaine

### CAS Registry Number

27262-47-1

### Drug Class

Breast Feeding

Lactation

Anesthetics, Local